# Lidocaine

CASRN: 137-58-6

## Drug Levels and Effects

### Summary of Use during Lactation

Lidocaine concentrations in milk during continuous IV infusion, epidural administration and in high doses as a local anesthetic are low and the lidocaine is poorly absorbed by the infant. Lidocaine is not expected to cause any adverse effects in breastfed infants. No special precautions are required.[1-3]

Lidocaine during labor and delivery with other anesthetics and analgesics has been reported by some to interfere with breastfeeding. However, this assessment is controversial and complex because of the many different combinations of drugs, dosages and patient populations studied as well as the variety of techniques used and deficient design of many of the studies. Overall it appears that with good breastfeeding support epidural lidocaine with or without fentanyl or one of its derivatives has little or no adverse effect on breastfeeding success.[4-9] Labor pain medication may delay the onset of lactation.

### Drug Levels

Maternal Levels. A nursing mother who was 10 months postpartum was given intravenous lidocaine 75 mg, then 50 mg 5 minutes later, concurrent with starting a continuous lidocaine infusion at a rate of 2 mg/minute. After 7 hours the infusion was stopped a milk sample was provided. The breastmilk contained 800 mcg/L of lidocaine; metabolites were not measured.[1]

A woman received 20 mg of lidocaine with 5 mg of epinephrine (2 mL of a 2% lidocaine with 0.5% epinephrine) injected for a dental procedure 3 days postpartum. Milk levels 2 hours after the injection were 66 mcg/L of lidocaine and 35 mcg/L of its MEGX metabolite. At 6.5 hours after the dose, the levels were 44 mcg/L and 41 mcg/L, respectively.[10]

Twenty-two women received epidural lidocaine 2% and bupivacaine 0.5% for pain control during cesarean delivery. Lidocaine dosage averaged 183 mg (range 60 to 500 mg). Average milk lidocaine concentrations were 860 mcg/L at 2 hours after delivery, 460 mcg/L at 4 hours after delivery and 220 mcg/L at 12 hours after delivery.[2]

A woman undergoing tumescent liposuction received 4.2 grams of lidocaine into her fat. Seventeen hours after the procedure, the milk lidocaine level was 550 mcg/L. It was previously shown that maximum serum lidocaine concentrations occur at about this time.[3]

Six women were given 3.6 mL of lidocaine 2% without epinephrine and a seventh received 4.5 mL and 7.2 mL lidocaine 2% without epinephrine on two separate occasions for dental procedures. Milk lidocaine concentrations averaged 120.5 mcg/L at 3 hours after the dose and 58.3 mcg/L 6 hours after the dose. Milk MEGX levels were 97.5 and 52.7 mcg/L at 3 and 6 hours after the dose, respectively.[11] Using the average daily intake reported in this study, an exclusively breastfed infant would receive 0.9% of the maternal weight-adjusted dosage of lidocaine and another 0.8% in the form of the metabolite MEGX.

A mother donated 3 mL of breastmilk before 100 mg of lidocaine injection for dental anesthesia and at 30 minutes, 1 hour, and 2 hours after administration using an electric breast pump. The peak milk concentration of lidocaine of 1073 mcg/L occurred 30 minutes after administration and fell to about 200 mcg/L at 2 hours after the dose.[12]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Lidocaine in doses ranging from 60 to 500 mg administered to the mother by intrapleural or epidural routes during delivery had no effect on their 14 infants who were either breastfed or received their mother's breastmilk by bottle.[2]

A neurology group reported using 1% lidocaine for peripheral nerve blocks in 14 nursing mothers with migraine. They reported no infant side effects and considered the procedure safe during breastfeeding.[13]

### Effects on Lactation and Breastmilk

A randomized study compared three groups of women undergoing elective cesarean section who received subcutaneous infusion of 20 mL of lidocaine 1% plus epinephrine 1:100:000 at the incision site. One group received the lidocaine before incision, one group received the lidocaine after the incision, and the third received 10 mL before the incision and 10 mL after. Women in the pre-and post-incision administration group initiated breastfeeding earlier than those in the pre-incision administration (3.4 vs 4.1 hours). There was no difference between the post-incision administration group and the other groups in time to breastfeeding initiation.[14]

A national survey of women and their infants from late pregnancy through 12 months postpartum compared the time of lactogenesis II in mothers who did and did not receive pain medication during labor. Categories of medication were spinal or epidural only, spinal or epidural plus another medication, and other pain medication only. Women who received medications from any of the categories had about twice the risk of having delayed lactogenesis II (>72 hours) compared to women who received no labor pain medication.[15]

An Egyptian study compared lidocaine 2% (n = 75) to lidocaine 2% plus epinephrine 1:200,000 (n = 70) as a wound infiltration following cesarean section. Patients who received epinephrine in combination with lidocaine began breastfeeding at 89 minutes following surgery compared to 132 minutes for those receiving lidocaine alone. The difference was statistically significant.[16]

### Alternate Drugs to Consider

Bupivacaine, Ropivacaine

### References

1 Zeisler J, Gaarder T, De Mesquita S. Lidocaine excretion in breast milk. Drug Intell Clin Pharm 1986;20:691-3.3757781
2 Ortega D, Viviand X, Lorec A, et al. Excretion of lidocaine and bupivacaine in breast milk following epidural anesthesia for cesarean delivery. Acta Anaesthesiol Scand 1999;43:394-7.10225071
3 Dryden R, Lo M. Breast milk lidocaine levels in tumescent liposuction. Plast Reconstr Surg 2000;105:2267-8.10839430
4 Reynolds F. Labour analgesia and the baby: Good news is no news. Int J Obstet Anesth 2011;20:38-50.21146977
5 Loubert C, Hinova A, Fernando R. Update on modern neuraxial analgesia in labour: A review of the literature of the last 5 years. Anaesthesia 2011;66:191-212.21320088
6 Shrestha B, Devgan A, Sharma M. Effects of maternal epidural analgesia on the neonate--a prospective cohort study. Ital J Pediatr 2014;40:99.25492043
7 Zuppa A, Alighieri G, Riccardi R, et al. Epidural analgesia, neonatal care and breastfeeding. Ital J Pediatr 2014;40:82.25432659
8 French C, Cong X, Chung K. Labor epidural analgesia and breastfeeding: A systematic review. J Hum Lact 2016;32:507-20.27121239
9 Heesen P, Halpern S, Beilin Y, et al. Labor neuraxial analgesia and breastfeeding: An updated systematic review. J Clin Anesth 2020;68:110105.33069970
10 Lebedevs T, Wojnar-Horton R, Yapp P, et al. Excretion of lignocaine and its metabolite monoethylglycinexylidide in breast milk following its use in a dental procedure. A case report. J Clin Periodontol 1993;20:606-8.8408724
11 Giuliani M, Grossi G, Pileri M, et al. Could local anesthesia while breast-feeding be harmful to infants? J Pediatr Gastroenterol Nutr 2001;32:142-4.11321382
12 Liu S, Wu X, Liu D, et al. Development and application of a quantitative LC-MS/MS assay for the analysis of four dental local anesthetics in human plasma and breast milk. J Chromatogr B Analyt Technol Biomed Life Sci 2024;1250:124384.39577311
13 Juanatey A, Ruíz M, Blanco L, et al. Results of peripheral nerve blocks in migraine patients during pregnancy and breastfeeding. Cephalalgia 2016;36 (1 Suppl):24. doi:10.1177/0333102416670318
14 Fouladi R, Navali N, Abbassi A. Pre-incisional, post-incisional and combined pre- and post-incisional local wound infiltrations with lidocaine in elective caesarean section delivery: A randomised clinical trial. J Obstet Gynaecol 2013;33:54-9.23259880
15 Lind J, Perrine C, Li R. Relationship between use of labor pain medications and delayed onset of lactation. J Hum Lact 2014;30:167-73.24451212
16 Tharwat A, Yehia A, Wahba K, et al. Efficacy and safety of post-cesarean section incisional infiltration with lidocaine and epinephrine versus lidocaine alone in reducing postoperative pain: A randomized controlled double-blinded clinical trial. J Turk Ger Gynecol Assoc 2016;17:1-5.27026771

## Substance Identification

### Substance Name

Lidocaine

### CAS Registry Number

137-58-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiarrhythmics

Local Anesthetics